# Pirtobrutinib

CASRN: 2101700-15-4

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of pirtobrutinib during breastfeeding. Because it is 96% bound to plasma proteins, concentrations in milk are likely to be low. The manufacturer recommends that breastfeeding be discontinued during pirtobrutinib therapy and for 1 week after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Pirtobrutinib

### CAS Registry Number

2101700-15-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Enzyme Inhibitors

Protein Kinase Inhibitors

Signal Transduction Inhibitors